# Aceclofenac

CASRN: 89796-99-6

## Drug Levels and Effects

### Summary of Use during Lactation

Aceclofenac is not approved for marketing in the United States by the U.S. Food and Drug Administration but is available in other countries. No information is available on the use of aceclofenac during breastfeeding. Because it is over 99% protein bound, the amounts in milk are likely to be very low. If a mother requires aceclofenac, it is not a reason to discontinue breastfeeding; however, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

## Substance Identification

### Substance Name

Aceclofenac

### CAS Registry Number

89796-99-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Inflammatory Agents, Non-Steroidal